# Hydromorphone

CASRN: 466-99-9

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that hydromorphone is excreted into breastmilk in small amounts, but large maternal dosages have caused neonatal central nervous system depression. In general, Maternal use of oral opioids during breastfeeding can cause infant drowsiness, which may progress to rare but severe central nervous system depression. Newborn infants seem to be particularly sensitive to the effects of even small dosages of narcotic analgesics. If hydromorphone is required by the mother of a newborn, it is not a reason to discontinue breastfeeding; however, once the mother’s milk comes in, it is best to provide pain control with a nonnarcotic analgesic and limit maternal intake of hydromorphone to 2 to 3 days at a low dosage with close infant monitoring.[1] If the baby shows signs of increased sleepiness (more than usual), difficulty breastfeeding, breathing difficulties, or limpness, a physician should be contacted immediately. Withdrawal symptoms can occur in breastfed infants when maternal administration of an opioid analgesic is stopped, or when breastfeeding is stopped.

### Drug Levels

In adults, hydromorphone has an oral bioavailability of 62% and is metabolized to inactive metabolites. While not commonly used in infants, an appropriate dose for this age group is 10 mcg/kg parenterally or 30 mcg/kg orally every 4 hours as needed.

Maternal Levels. Eight lactating women (time postpartum not given) were given a single 2 mg intranasal dose of hydromorphone. Milk was collected 7 times, beginning 2 hours after and ending 24 hours after the dose. Peak milk levels occurred 2 hours after the dose. The half-life of elimination from milk was 10.5 hours. The reported average milk level, over the 24 hour period after the single dose, was about 1 mcg/L. The authors calculated that an exclusively breastfed infant would receive 0.67% of the maternal weight-adjusted dosage.[2] Using the average milk level reported in this study, an exclusively breastfed infant would receive 0.15 mcg/kg daily from a single maternal 2 mg intranasal hydromorphone dose. Intranasal hydromorphone is not currently available in the US.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A 6-day-old infant was being partially breastfed by a mother who was taking oral hydromorphone 4 mg every 4 hours for pain following a cesarean section. The infant was brought to the emergency department because of excessive drowsiness. The infant was having intermittent bradycardia and had an apneic event requiring bag-valve-mask intervention. The infant received 0.36 mg of naloxone and within 30 seconds developed spontaneous respirations, a heart rate of 165 beats/minute and increased alertness. Fifteen minutes later, he had another apneic episode that resolved rapidly with another dose of naloxone. Extensive laboratory testing found that all tests were negative, including a urine opiate screen. The authors note that most urine opiate screening tests are insensitive to semisynthetic opiates such as hydromorphone that are not metabolized to morphine.[3] The infant’s apnea was probably caused by hydromorphone in breastmilk.

An infant was born to a mother with opioid use disorder who was taking up to 2 grams of intravenous fentanyl daily. In the hospital she was transitioned to intravenous hydromorphone 120 mg three times daily, oral hydromorphone 32 mg every hour as needed, and methadone 70 mg daily by mouth. After 9 days of tapering the oral morphine dosage, the infant was given 72 mL of the mother’s expressed milk. On day 10, the infant received two doses of 0.1 mg of oral morphine and then breastfed for 30 minutes 3 hours after a maternal dose of 110 mg of intravenous hydromorphone. The infant was alert and active, feeding and sleeping well, and the infant’s morphine was discontinued. There were no clinically relevant episodes of apnea, bradycardia, desaturation, signs of respiratory depression, or excessive sedation. The infant continued to receive formula plus either breastfeeding or expressed milk with no clinically important adverse effects. The mother’s hydromorphone dose was tapered over 47 days while oral methadone and oral slow-release morphine were increased to 190 mg and 1200 mg daily, respectively, and she was discharged on day 58 postpartum. The extent of breastfeeding after hospital discharge was not reported. At 4 months of age, the infant scored above average on all developmental domains.[4]

In population study in the province of Ontario, Canada, 85,852 who filled an opioid prescription within seven days of discharge after delivery were matched to 538,815 did not. Compared with infants born to mothers who were not prescribed an opioid, those born to mothers prescribed an opioid were no more likely to be admitted to hospital in the 30 days after the index date. Infants born to mothers prescribed opioids after delivery were slightly more likely to be taken to the emergency department in the subsequent 30 days (hazard ratio 1.04). No infant deaths occurred. Twelve percent of the mothers prescribed an opioid were prescribed hydromorphone. Of note is that the median drug supply was for 3 days (IQR 2-4).[5]

### Effects on Lactation and Breastmilk

Opioids can increase serum prolactin.[6] However, the prolactin level in a mother with established lactation may not affect her ability to breastfeed.

A randomized study in women receiving a cesarean section compared postoperative patient-controlled analgesia with hydromorphone 0.2 mg/kg to sufentanil 2 mcg/kg. Both regimens included intravenous palonosetron 4 mcg/kg. The hydromorphone group had higher breastfeeding satisfaction at 72 hours postpartum. The frequency of dizziness and drowsiness within 48 hours also was lower in the hydromorphone group.[7]

A randomized trial allotted women undergoing cesarean section to receive combined spinal-epidural anesthesia with either sufentanil 3 mcg/kg or hydromorphone 0.15 mg/kg plus each group received tropisetron 0.1 mg/kg diluted to 150 mL. The times to first lactation were no different between the groups.[8]

### Alternate Drugs to Consider

Acetaminophen, Butorphanol, Fentanyl, Ibuprofen, Morphine

### References

1 Lamvu G, Feranec J, Blanton E. Perioperative pain management: An update for obstetrician-gynecologists. Am J Obstet Gynecol 2018;218:193-9.28666699
2 Edwards JE, Rudy AC, Wermeling DP, . Hydromorphone transfer into breast milk after intranasal administration. Pharmacotherapy 2003;23:153-8.12587803
3 Schultz ML, Kostic M, Kharasch S. A case of toxic breast-feeding? Pediatr Emerg Care 2019;35:E9-E10.28067687
4 Patricelli CJ, Gouin IJ, Gordon S, . Breastfeeding on injectable opioid agonist therapy: A case report. J Addict Med 2022;7:222-6.
5 Zipursky JS, Gomes T, Everett K, . Maternal opioid treatment after delivery and risk of adverse infant outcomes: Population based cohort study. Bmj 2023;380:e074005.36921977
6 Tolis G, Dent R, Guyda H. Opiates, prolactin, and the dopamine receptor. J Clin Endocrinol Metab 1978;47:200-3.263291
7 Zhao Y, Shi J, Zhao H, . Effects of hydromorphone-based patient-controlled intravenous analgesia on postpartum depression after cesarean section: A prospective randomized controlled trial. Front Med (Lausanne) 2026;12:1731005.41601800
8 Zhu Y, Wang C, Chen X, . Effects of hydromorphone for patient-controlled intravenous analgesia on postpartum depression and sleep disorders after cesarean section: a randomized, double-blind controlled trial. Front Pharmacol 2026;17:1802702.42110526

## Substance Identification

### Substance Name

Hydromorphone

### CAS Registry Number

466-99-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics, Opioid

Narcotics

Antitussive Agents

Opiates